# Fludarabine

CASRN: 21679-14-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of fludarabine during breastfeeding. Because of potential toxicity to the infant, the manufacturer recommends withholding breastfeeding during therapy and for one week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Fludarabine

### CAS Registry Number

21679-14-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents